# Torsemide

CASRN: 56211-40-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because little information is available on the use of torsemide during breastfeeding and because intense diuresis might decrease lactation, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Low doses of torsemide may not suppress lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Intense diuresis, fluid restriction and breast binding have been used to suppress lactation immediately postpartum.[1-4] The added contribution of the diuretic to the other measures, which are effective in suppressing lactation, has not been studied.

Women who delivered following pre-eclampsia were randomized to receive either torsemide 20 mg daily or placebo for 5 days starting within 24 hours after delivery. Eighty percent of the women who received torsemide and 75% of women who received placebo breastfed. One mother who received torsemide and none who received placebo reported a decrease in breastmilk.[5]

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;1:1353-4.4134342
2 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
3 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786
4 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858
5 Viteri OA, Alrais MA, Pedroza C, et al. Torsemide for prevention of persistent postpartum hypertension in women with preeclampsia: A randomized controlled trial. Obstet Gynecol 2018;132:1185-91.30303905

## Substance Identification

### Substance Name

Torsemide

### CAS Registry Number

56211-40-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Loop Diuretics